# Gadoxetate

CASRN: 135326-11-3

## Drug Levels and Effects

### Summary of Use during Lactation

Guidelines developed by North American professional organizations state that breastfeeding need not be disrupted after a nursing mother receives a gadolinium-containing contrast medium.[1-3] However, because there is no published experience with gadoxetate during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Gadobutrol, Gadoteridol, Gadoterate

### References

1 Copel J, El-Sayed Y, Heine RP, et al. Committee Opinion No. 723: Guidelines for diagnostic imaging during pregnancy and lactation. Obstet Gynecol 2017;130:e210-e6 28937575
2 American College of Radiology Committee on Drugs and Contrast Media. Administration of contrast media to breast-feeding mothers. In, ACR manual on contrast media. 2023;Version 2023:120-1. https://www.acr.org/Clinical-Resources/Contrast-Manual
3 Bookwalter CA, McDonald RJ, Packard AT, et al. Contrast media in pregnant and lactating patients, from the AJR special series on contrast media. AJR Am J Roentgenol 2024;224:e2431415 39046138

## Substance Identification

### Substance Name

Gadoxetate

### CAS Registry Number

135326-11-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contrast Media

Diagnostic Agents